# Sulfamethoxazole

CASRN: 723-46-6

## Drug Levels and Effects

### Summary of Use during Lactation

With healthy, fullterm infants it appears acceptable to use sulfamethoxazole during breastfeeding after the newborn period. The time of greatest risk for hemolysis in fullterm newborns without glucose-6-phosphate dehydrogenase (G6PD) deficiency might be as short as 8 days after birth.[1] Until further data are accumulated, alternate agents should probably be used in jaundiced, ill, stressed or premature infants, because of the risk of bilirubin displacement and kernicterus. Sulfamethoxazole should be avoided while breastfeeding a G6PD deficient infant.[2]

### Drug Levels

Maternal Levels. Forty women who were 5 or fewer days postpartum period received oral co-trimoxazole equivalent to 800 mg of sulfamethoxazole twice daily. Another 10 women were given this dose three times daily. Milk levels were measured several times daily for 5 days. Average sulfamethoxazole levels were 4.5 and 5.3 mg/L, respectively, with the 2 dosages.[3] With the usual dose of sulfamethoxazole 800 mg daily, an exclusively breastfed infant would be expected to receive 0.68 mg/kg daily of sulfamethoxazole. This is very low in comparison to the established treatment dosage 40 mg/kg daily for infants over 2 months of age.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

An extensive systematic review of the use of sulfonamides near term and during breastfeeding found no adverse reactions in infants. The authors concluded that use of sulfamethoxazole during breastfeeding presents no risk of neonatal kernicterus.[4]

A prospective, controlled study asked mothers who called an information service about adverse reactions experience by their breastfed infants. Of 12 women who took sulfamethoxazole and trimethoprim during breastfeeding (time postpartum and dosage not reported), none reported diarrhea, drowsiness or irritability in her infant. Two mothers reported poor feeding in their infants.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Sulfisoxazole, Trimethoprim-Sulfamethoxazole

### References

1 Zao J, Koren G, Bozzo P. Using nitrofurantoin while breastfeeding a newborn. Can Fam Physician 2014;60:539-40.24925943
2 Chung AM, Reed MD, Blumer JL. Antibiotics and breast-feeding: A critical review of the literature. Paediatr Drugs 2002;4:817-37.12431134
3 Miller RD, Salter AJ. The passage of trimethoprim/sulfamethoxazole into breast milk and its significance. . In: Daikos C, ed. Progress in chemotherapy Volume 1 Antibacterial chemotherapy1974:687-91.
4 Forna F, McConnell M, Kitabire FN, et al. Systematic review of the safety of trimethoprim-sulfamethoxazole for prophylaxis in HIV-infected pregnant women: Implications for resource-limited settings. AIDS Rev 2006;8:24-36.16736949
5 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418

## Substance Identification

### Substance Name

Sulfamethoxazole

### CAS Registry Number

723-46-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Sulfonamides